# Estradiol Cypionate

CASRN: 313-06-4

## Drug Levels and Effects

### Summary of Use during Lactation

Estradiol cypionate has not been studied during breastfeeding. However, a similar drug, estradiol valerate, has been used to suppress lactation. Estradiol cypionate should be avoided in mothers wishing to breastfeed, especially if started before the milk supply is well established at about 6 weeks postpartum. The decrease in milk supply can happen over the first few days of estrogen exposure.[1]

### Drug Levels

Maternal Levels. Relevant published information on estradiol cypionate was not found as of the revision date. However, estradiol appears in breastmilk in small amounts after administration by other routes.[2,3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A telephone follow-up of 16 women taking short-term high dose estradiol valerate found no adverse effects on appetite or growth in their breastfed infants at a median follow-up age of 13 months. The median age of the infant at the start of therapy was 2 months (range 1.5 to 4 months) and the median daily dose was 2 mg (range 1 to 4 mg).[4]

### Effects on Lactation and Breastmilk

Another injection ester form of estradiol, estradiol valerate was previously used therapeutically to suppress lactation, usually in combination with testosterone.[5-7]

A retrospective cohort study compared 371 women who received high-dose estrogen (either 3 mg of diethylstilbestrol or 150 mcg of ethinyl estradiol daily) during adolescence for adult height reduction to 409 women who did not receive estrogen. No difference in breastfeeding duration was found between the two groups, indicating that high-dose estrogen during adolescence has no effect on later breastfeeding.[8]

Eight women taking estradiol valerate or estradiol hemihydrate in a median daily dose of 2 mg (range 1 to 4 mg) were followed up by telephone. The median time postpartum at the start of therapy was 2 months (range 1.5 to 4 months). The mean breastfeeding duration was 8.5 months. However, 8 of the women experienced a decrease in milk supply and 3 required supplementation with milk production not returning in these three.[4]

### Alternate Drugs to Consider

Ethinyl Estradiol

### References

1 Moses-Kolko EL, Berga SL, Kalro B, et al. Transdermal estradiol for postpartum depression: A promising treatment option. Clin Obstet Gynecol 2009;52:516-29 19661765
2 Nilsson S, Nygren KG, Johansson ED. Transfer of estradiol to human milk. Am J Obstet Gynecol 1978;132:653-7 717472
3 Perheentupa A, Critchley HO, Illingworth PJ, et al. Enhanced sensitivity to steroid-negative feedback during breast-feeding: Low-dose estradiol (transdermal estradiol supplementation) suppresses gonadotropins and ovarian activity assessed by inhibin B. J Clin Endocrinol Metab 2000;85:4280-6 11095468
4 Shalit S, Yehuda S, De-Haan T, et al. High dose estrogen during breastfeeding-a prospective study. Neurotoxicol Teratol 2025;109 (Suppl 2):25-6.doi:10.1016/j.ntt.2025.107515
5 Louviere RL, Upton RT. Evaluation of Deladumone OB in the suppression of postpartum lactation. Am J Obstet Gynecol 1975;121:641-2 1090174
6 Morris JA, Creasy RK, Hohe PT. Inhibition of puerperal lactation. Double-blind comparison of chlorotrianesene, testosterone enanthate with estradiol valerate and placebo. Obstet Gynecol 1970;36:107-14 4912251
7 Iliya FA, Safon L, O'Leary JA. Testosterone enanthate (180 mg.) and estradiol valerate (8 mg.) for suppression of lactation: A double-blind evaluation. Obstet Gynecol 1966;27:643-5 5949195
8 Jordan HL, Bruinsma FJ, Thomson RJ, et al. Adolescent exposure to high-dose estrogen and subsequent effects on lactation. Reprod Toxicol 2007;24:397-402 17531440

## Substance Identification

### Substance Name

Estradiol Cypionate

### CAS Registry Number

313-06-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Estrogens

Hormones